# Trastuzumab

CASRN: 180288-69-1

## Drug Levels and Effects

### Summary of Use during Lactation

Trastuzumab milk concentrations were collected in one mother. Concentrations were low, consistent with it being a large protein molecule with a molecular weight of about of 145,531 Da.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, trastuzumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be discontinued during trastuzumab therapy and for 7 months after the last dose.

### Drug Levels

Maternal Levels. A woman was diagnosed with breast cancer in pregnancy and received five cycles of 75 mg docetaxel during pregnancy. As soon as clinically feasible postpartum, she was given trastuzumab 600 mg intravenously in the first cycle. Fifteen milk samples were collected over 17 days after the first dose except for days 6, 8, and 14 because no milk was produced on those days. Milk trastuzumab concentrations ranged between 12.7 and 977 mcg/L, with the highest concentration found 10 days after the dose.[3] The authors calculated relative infant dosage in a nonstandard way that did not take low oral bioavailability into account, thereby overstating infant exposure, so it is not reported here.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Buitelaar PLM, Pluim D, Hanssens S, et al. Transfer of trastuzumab and pertuzumab into human breast milk: A case report. Cancer Chemother Pharmacol 2026;96:53.42159752

## Substance Identification

### Substance Name

Trastuzumab

### CAS Registry Number

180288-69-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents